# Natamycin

CASRN: 7681-93-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of natamycin during breastfeeding. However, other polyene antibiotics are poorly excreted into breastmilk and poorly absorbed by infants. Although unlikely, use of natamycin in the eye might disrupt the breastfed infant’s gastrointestinal flora. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 2 to 5 minutes, then remove the excess solution with an absorbent tissue. If a mother requires natamycin, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Natamycin

### CAS Registry Number

7681-93-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibacterial Agents

Anti-Infective Agents, Local

Antifungal Agents